# Ziconotide

CASRN: 107452-89-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ziconotide during breastfeeding. Ziconotide is usually not detectable or barely detectable in plasma after intrathecal administration, and because it is a peptide with a molecular weight of 2639 Daltons, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. If ziconotide is required by the mother, it is not a reason to discontinue breastfeeding. Breastfed infants should be monitored for sedation, which may result in respiratory depression or feeding problems.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ziconotide

### CAS Registry Number

107452-89-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Non-Narcotic

Calcium Channel Blockers

Neuroprotective Agents